# Efinaconazole

CASRN: 164650-44-6

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Topical efinaconazole has not been studied during breastfeeding. Because maternal blood levels are very low after topical application to the toenails, it is unlikely that a measurable amount of the drug will enter the breastmilk.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ciclopirox, Tavaborole, Terbinafine

## Substance Identification

### Substance Name

Efinaconazole

### CAS Registry Number

164650-44-6

### Drug Class

- Breast Feeding
- Lactation
- Anti-Infective Agents
- Antifungal Agents